# Oral Levonorgestrel

CASRN: 797-63-7

## Drug Levels and Effects

### Summary of Use during Lactation

This record contains information specific to oral levonorgestrel used alone for contraception. Those with an interest in a combination oral contraceptive should consult the record entitled, Contraceptives, Oral, Combined.

Although nonhormonal methods are preferred during breastfeeding, progestin-only contraceptives such as levonorgestrel are considered the hormonal contraceptives of choice during lactation. Fair quality evidence indicates that levonorgestrel does not adversely affect the composition of milk, the growth and development of the infant or the milk supply. Expert opinion holds that the risks of progestin-only contraceptive products usually are acceptable for nursing mothers at any time postpartum.[1,2] Some evidence indicates that progestin-only contraceptives may offer protection against bone mineral density loss during lactation, or at least do not exacerbate it.[3-5] A large percentage of women who planned to breastfeed discontinued oral progestin-only contraceptives by 3 months postpartum[6] and progestin-only contraceptives often result in rapid repeat pregnancy in the absence of breastfeeding.[7] Postcoital levonorgestrel appears to have no long-term adverse effects on breastfeeding or the infant.[8-10]

### Drug Levels

Levonorgestrel is a synthetic progestin that is the active isomer of the racemate norgestrel. It is considered to be twice as potent on a weight basis as the racemic mixture.

Maternal Levels. Fifteen women who were fully breastfeeding and 8 weeks postpartum were given oral levonorgestrel either alone in a dose of 30 mcg daily or in an estrogen-containing oral contraceptive in a dose of 150 mcg or 250 mcg daily. Five women received each dose for 10 days before breastmilk sample collection. With the 30 mcg dose, the drug was undetectable in all of the women in prenursing milk (<0.05 mcg/L) or postnursing milk (<0.1 mcg/L) at 3 to 23 hours after the dose. With the 150 mcg dose, the highest levels in milk were found 3 hours after the dose with foremilk and hindmilk levels of 0.34 and 0.54 mcg/L, respectively; levels decreased to 0.11 and 0.17 mcg/L, respectively, at 23 hours after the dose. With the 250 mcg dose, the highest levels in milk were found 3 hours after the dose with foremilk and hindmilk levels of 0.51 and 1.05 mcg/L, respectively; levels decreased to 0.22 and 0.38 mcg/L, respectively, at 23 hours after the dose. The authors estimated that fully breastfed infants would receive 0.4 to 0.5 mcg daily in breastmilk, or about 0.1% of the total (not weight-adjusted) maternal dose.[11]

Two women with well-established lactation (exact time postpartum not stated) were given an oral contraceptive containing 150 mcg of levonorgestrel daily. Each had breastmilk levels measured on 2 occasions 10 to 12 hours after a dose between days 6 and 20 of use. The average of their levonorgestrel milk levels was 0.18 mcg/L (range 0.135 to 0.223 mcg/L).[12]

Milk levonorgestrel levels were measured in 4 women after daily ingestion of oral levonorgestrel 50 or 150 mcg started after 3 months postpartum. Peak milk levonorgestrel levels occurred between 1 and 3 hours and were in the ranges of 0.06 to 0.2 mcg/L after the 50 mcg dose and 0.35 to 0.45 mcg/L after the 150 mcg dose. After the 50 mcg dose, milk levels dropped to undetectable (<0.05 mcg/L) by 4 hours after the dose. After the 150 mcg dose, milk levels dropped to about 0.35 mcg/L at 4 hours after the dose and remained there for the next 2 hours.[13]

At 6 to 20 weeks postpartum, 10 women received single tablets containing 30 mcg of levonorgestrel and another 15 women received a single tablet of a combination oral contraceptive containing 250 mcg of levonorgestrel. At 2 to 2.5 hours after the dose, a foremilk sample was taken. The mothers breastfed their infants and then a hindmilk sample was taken. The 2 samples were pooled for assay. After the 30 mcg dose, milk levels averaged 0.05 mcg/L (range 0.03 to 0.076 mcg/L); after the 250 mcg dose, milk levels averaged 0.64 mcg/L (range 0.3 to 1.3 mcg/L).[14]

Twelve breastfeeding women averaging 11.1 weeks postpartum (range 6 and 12 weeks) received a single dose of 1.5 mg of levonorgestrel orally. Blood and milk samples were obtained over the next 72 hours. Peak milk levels of levonorgestrel occurred 3.9 hours after the dose; milk levels fell with a mean half-life in milk of 26 hours. The mean concentration in milk was 1.7 mcg/L during the first day, 0.4 mcg/L the second day and 0.2 mcg/L on the third day after the dose. The authors estimated that a fully breastfed infant would receive 1.6 mcg of levonorgestrel in the first 24 hours, 0.3 mcg in the second 24 hours, and 0.2 mcg in the third 24 hours after the dose.[15]

Infant Levels. Two 8-week old infants whose mothers were taking a combination oral contraceptive containing 250 mcg of levonorgestrel had plasma levels measured 5 hours after the maternal dose and 2 hours after nursing (i.e., nursed at the time of peak milk level). Plasma levels were 0.058 and 0.115 mcg/L in the 2 infants. A third infant whose mother was taking 30 mcg daily had undetectable (<0.005 mcg/L) plasma levonorgestrel. The authors concluded that these results indicate that the infants are able to metabolize levonorgestrel and that no accumulation occurs in infant plasma.[11]

At 6 to 20 weeks postpartum, 10 women received single tablets containing 30 mcg of levonorgestrel and another 15 women received a single tablet of a combination oral contraceptive containing 250 mcg of levonorgestrel. At 2 to 2.5 hours after the dose, the mothers breastfed their infants; infant serum samples were taken 1.5 to 2 hours later at about 4 hours after the maternal dose. Infant serum levels after the 30 and 250 mcg doses averaged 0.019 and 0.078 mcg/L, respectively. These levels were 2% and 1%, respectively, of peak maternal serum levels drawn at 2 to 2.5 hours after the dose.[14]

Thirty mothers received 30 mcg oral levonorgestrel tablets daily for 5 weeks. Ten began at 4 weeks postpartum, 10 began at 12 weeks postpartum and 10 began at 24 weeks postpartum. Because of assay and serum sample size limitations, serum samples were obtained from some breastfed infants during the first and fifth weeks of maternal therapy as representative of the entire group. Based on infant serum levels, the authors concluded that absorption of the drug was not great until 12 weeks postpartum and metabolism was not well developed until 24 weeks postpartum.[16] The unusual and incomplete blood sampling scheme casts some doubt on the results of this study.

### Effects in Breastfed Infants

One study found serum thyroid stimulating hormone levels to be lower in the infants exposed to levonorgestrel than in control infants.[17]

A nonrandomized trial compared 250 breastfed infants whose mothers received 30 mcg daily of oral levonorgestrel initiated 7 days postpartum to 250 infants whose mothers received nonhormonal contraception. No differences in height and weight gain were seen during the 9-month study period between the 2 groups.[18]

Multicenter, nonrandomized studies followed infants whose mothers received levonorgestrel contraception during breastfeeding, either as oral tablets of 37.5 mcg daily (n = 246) or as Norplant (n = 453). No adverse effects on infant growth through the first year were found in comparison to standard measurements.[19,20]

In a cohort study of 71 nursing women who took levonorgestrel as a postcoital contraceptive, none noticed any adverse effect in their infants.[8]

### Effects on Lactation and Breastmilk

Among a cohort study of 71 women who took levonorgestrel as a postcoital contraceptive during nursing, none reported any obvious decrease in milk supply after the drug was used.[8]

A study of 1158 postpartum randomized women using the lactational amenorrhea method (LAM) for birth control randomized to be given levonorgestrel as a postcoital contraceptive or given nothing. No difference in the duration of breastfeeding was found between women who used the levonorgestrel and those who did not.[9]

In a nonrandomized, nonblinded study comparing women who were breastfeeding at discharge, 102 postpartum women received depot medroxyprogesterone acetate (dosage not stated) in the early postpartum period (average 51.9 hours postpartum; range 6.25 to 132 hours), 181 received another progestin-only contraceptive and 138 used nonhormonal contraception. No differences in breastfeeding rates were seen at 2 and 6 weeks, but women receiving any hormonal contraceptive were breastfeeding at a lower rate (72.1% vs 77.6%) at 4 weeks postpartum. The authors concluded that progestin-only contraception initiated in the early postpartum period had no adverse effects on breastfeeding rates.[21]

A study analyzed data from a prospective cohort study of U.S. women from May 2005 through June 2007. Women were followed from the third trimester of pregnancy throughout the first year postpartum. Data from the subset of women who professed that intended to breastfeed for 3 months or longer postpartum during their third trimester of pregnancy and who were using a contraceptive at 3 months postpartum were analyzed (n = 1349). Women who intended to breastfeed for at least 4 months and were taking a progestin-only oral contraceptive, such as levonorgestrel, were 3.15 times more likely to be breastfeeding (exclusive or nonexclusive) at 4 months than women who used a nonhormonal contraceptive. Women who said they would breastfeed for 3 to 4 months had 4-month breastfeeding rates equivalent to those using a nonhormonal contraceptive. These rates were much higher than those of women who were taking an estrogen-containing, combined oral contraceptive.[22]

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Medroxyprogesterone Acetate, Norethindrone

### References

1 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Fifth Ed. 2015https://www.who.int/publications/i/item/9789241549158
2 Nguyen AT, Curtis KM, Tepper NK, et al. U.S. Medical Eligibility Criteria for Contraceptive Use, 2024. MMWR Recomm Rep 2024;73:1–126.39106314
3 Caird LE, Reid-Thomas V, Hannan WJ, et al. Oral progestogen-only contraception may protect against loss of bone mass in breast-feeding women. Clin Endocrinol (Oxf) 1994;41:739–45.7889609
4 Díaz S, Reyes MV, Zepeda A, et al. Norplant((R)) implants and progesterone vaginal rings do not affect maternal bone turnover and density during lactation and after weaning. Hum Reprod 1999;14:2499–505.10527977
5 Costa ML, Cecatti JG, Krupa FG, et al. Progestin-only contraception prevents bone loss in postpartum breastfeeding women. Contraception 2012;85:374–80.22036473
6 Uhm S, García-Ruiz N, Creinin MD, et al. Progestin-only pill use over 6 months postpartum. Contraception 2020;102:251–3.32544400
7 Sackeim MG, Gurney EP, Koelper N, et al. Effect of contraceptive choice on rapid repeat pregnancy. Contraception 2019;99:184–6.30471261
8 Polakow-Farkash S, Gilad O, Merlob P, et al. Levonorgestrel used for emergency contraception during lactation-A prospective observational cohort study on maternal and infant safety. J Matern Fetal Neonatal Med 2013;26:219–21.22928541
9 Shaaban OM, Hassen SG, Nour SA, et al. Emergency contraceptive pills as a backup for lactational amenorrhea method (LAM) of contraception: A randomized controlled trial. Contraception 2013;87:363–9.22935323
10 Jatlaoui TC, Riley H, Curtis KM. Safety data for levonorgestrel, ulipristal acetate and Yuzpe regimens for emergency contraception. Contraception 2016;93:93–112.26546020
11 Nilsson S, Nygren KG, Johansson ED. d-Norgestrel concentrations in maternal plasma, milk, and child plasma during administration of oral contraceptives to nursing women. Am J Obstet Gynecol 1977;129:178–84.900181
12 Saxena BN, Shrimanker K, Grudzinskas JG. Levels of contraceptive steroids in breast milk and plasma of lactating women. Contraception 1977;16:605–13.606500
13 Toddywalla VS, Mehta S, Virkar KD, et al. Release of 19-nor-testosterone type of contraceptive steroids through different drug delivery systems into serum and breast milk of lactating women. Contraception 1980;21:217–23.7389350
14 Betrabet SS, Shikary ZK, Toddywalla VS, et al. ICMR Task Force Study on hormonal contraception. Transfer of norethisterone (NET) and levonorgestrel (LNG) from a single tablet into the infant's circulation through the mother's milk. Contraception 1987;35:517–22.3117488
15 Gainer E, Massai R, Lillo S, et al. Levonorgestrel pharmacokinetics in plasma and milk of lactating women who take 1.5 mg for emergency contraception. Hum Reprod 2007;22:1578–84.17337471
16 Patel SB, Toddywalla VS, Betrabet SS, et al. At what 'infant-age' can levonorgestrel contraceptives be recommended to nursing mothers. Adv Contracept 1994;10:249–55.7740991
17 Bassol S, Nava-Hernandez MP, Hernandez-Morales C, et al. Effects of levonorgestrel implant upon TSH and LH levels in male infants during lactation. Int J Gynaecol Obstet 2002;76:273–7.11880130
18 McCann MF, Moggia AV, Higgins JE, et al. The effects of a progestin-only oral contraceptive (levonorgestrel 0.03 mg) on breast-feeding. Contraception 1989;40:635–48.2515939
19 Anon. Progestogen-only contraceptives during lactation: I. Infant growth. World Health Organization Task force for Epidemiological Research on Reproductive Health; Special Programme of Research, Development and Research Training in Human Reproduction. Contraception 1994;50:35–53.7924321
20 Anon. Progestogen-only contraceptives during lactation: II. Infant development. World Health Organization, Task Force for Epidemiological Research on Reproductive Health; Special Programme of Research, Development, and Research Training in Human Reproduction. Contraception 1994;50:55–68.7924322
21 Halderman LD, Nelson AL. Impact of early postpartum administration of progestin-only hormonal contraceptives compared with nonhormonal contraceptives on short-term breast-feeding patterns. Am J Obstet Gynecol 2002;186:1250–6.12066106
22 Goulding AN, Wouk K, Stuebe AM. Contraception and breastfeeding at 4 months postpartum among women intending to breastfeed. Breastfeed Med 2018;13:75–80.29091478

## Substance Identification

### Substance Name

Oral Levonorgestrel

### CAS Registry Number

797-63-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents, Female

Contraceptives, Oral, Synthetic

Contraceptives, Postcoital